# Ropinirole

CASRN: 91374-21-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ropinirole during breastfeeding, but it suppresses serum prolactin and may interfere with breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on nursing mothers was not found as of the revision date. Ropinirole lowers serum prolactin. It has successfully been used clinically to reduce prolactin levels in women with hyperprolactinemia with relief of galactorrhea.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Acton G, Broom C. A dose rising study of the safety and effects on serum prolactin of SK&F 101468, a novel dopamine d2-receptor agonist. Br J Clin Pharmacol 1989;28:435-41.2574051
2 Heneghan LJ, Tsang A, Dimino C, et al. Ropinirole for the treatment of hyperprolactinemia: A dose escalation study of efficacy and tolerability. J Clin Endocrinol Metab 2024;109:e667-e674.37715962

## Substance Identification

### Substance Name

Ropinirole

### CAS Registry Number

91374-21-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agonists